# Encorafenib

CASRN: 1269440-17-6

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of encorafenib during breastfeeding. The manufacturer recommends that breastfeeding be discontinued during encorafenib therapy and for at least 2 weeks after the final dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Encorafenib

### CAS Registry Number

1269440-17-6

### Drug Class

Breast Feeding

Lactation

Antineoplastic Agents

Enzyme Inhibitors

Protein Kinase Inhibitors

Signal Transduction Inhibitors